# Jasmine

CASRN: 8024-43-9

## Drug Levels and Effects

### Summary of Use during Lactation

Jasmine (Jasminum spp.) flowers contain a variety of chemicals, although none have been identified with specific pharmacologic activity. In India (ayurvedic medicine), jasmine has been used to suppress lactation, and one published study found that jasmine leaves applied to the breasts suppressed postpartum lactation as effectively as oral bromocriptine.[1-3] However, the study was not of high quality. No data exist on the excretion of any components of jasmine into breastmilk or on the safety and efficacy of jasmine in nursing mothers or infants. Jasmine is "generally recognized as safe" (GRAS) as a food ingredient by the U.S. Food and Drug Administration. Occasional allergic reactions to jasmine have been reported. It is unlikely typical jasmine intake, such as drinking small amounts of jasmine tea, would be harmful during nursing.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized, crossover trial compared a compounded hydro-alcoholic extract of jasmine flowers (Jasminum sambac) to placebo, both as nasal drops. Subjects were nonlactating women who had elevated serum prolactin values caused by antipsychotic drug therapy. The trial was designed as double-blind trial, but participants could smell the difference between placebo and active preparations. The mean reduction in serum prolactin at the end of intervention in the jasmine extract group was 10.5 mcg/L, which was not statistically significant. Overall, 10 of 35 women responded with a drop of 25 mcg/L or greater in serum prolactin; nonresponders tended to be on higher doses of antipsychotics or on olanzapine.[4]

A nonrandomized, unblinded study compared the daily topical application of jasmine (Jasminum sambac) flowers to the breasts to oral bromocriptine 2.5 mg three times a day to suppress lactation in postpartum women in India. At the end of 72 hours, almost all women in both groups had their lactation suppressed, although the women in the bromocriptine group had lower serum prolactin levels than those in the jasmine group.[2] Because of the lack of a placebo group, it is not possible to tell if the jasmine flowers had any effect beyond merely the lack of nipple stimulation.

### References

1 Acharya SR. (1987). Jasmine--the lactifuge. J Assoc Physicians India.
2 Shrivastav P, George K, Balasubramaniam N, et al. (1988). Suppression of puerperal lactation using jasmine flowers (Jasminum sambac). Aust N Z J Obstet Gynaecol.
3 Amuthavalluvan V, Devarapalli J. (2011). Indigenous knowledge and health seeking behavior among Kattunayakan: A tribe in transition. Glob J Human Soc Sci.
4 Finny P, Stephen C, Jacob R, et al. (2015). Jasmine flower extract lowers prolactin. Trop Doct.

## Substance Identification

### Substance Name

Jasmine

### Scientific Name

Jasminum grandiflorum Jasminum officinale Jasminum sambac

### CAS Registry Number

8024-43-9

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal